# Pistachio

## Drug Levels and Effects

### Summary of Use during Lactation

This record has information on Pistacia vera, which is the common edible pistachio nut, as well as Pistacia atlantica. Maternal pistachio nut consumption can cause allergies in their breastfed infants and pistachio allergy is cross-reactive with cashews. Although not widely described as a galactogogue, one woman consumed 2 to 3 cups daily of a tea made from the buds of the Pistacia vera tree for 3 to 4 weeks as a galactogogue and developed liver toxicity, possibly from the tea.[1]

Pistacia atlantica ointment appeared to be more effective than expressed breastmilk in treating nipple pain and fissures.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A study of 912 infants in Türkiye with food allergy were evaluated before 24 months of age. During the first 6 months of life, 83.7% were exclusively breastfed, 15.8% were mixed-fed with formula, and 0.5% were exclusively formula-fed. Overall, 13.2% of the infants with food allergies were allergic to pistachio. Out of 61 exclusively breastfed infants with food allergies, 1 had an allergy to pistachio in the first 3 months of life and 3 had allergy to pistachio during the period of 4 to 6 months of age.[2]

A 22-month-old girl developed facial hives on twice during breastfeeding that resolved spontaneously within 2 hours. These events were two months apart and she tolerated breastfeeding between the events. On both occasions the mother had eaten a large quantity of pistachios an hour earlier. The mother then ingested 100 grams of pistachio nuts 12, 5 and 1 hour prior to collecting 150 mL of breastmilk and a 10 mL aliquot of this was fed to the child. The patient developed facial and neck erythema and wheals, which subsided spontaneously after 20 minutes. Skin prick tests with commercial antigens were positive for pistachio, cashew and walnut, but negative with the mother’s milk collected after pistachio ingestion. After instructing the mother to follow a pistachio- and cashew-free diet, the patient had no further reactions with breast milk feedings.[3]

### Effects on Lactation and Breastmilk

Pistacia atlantica in an ointment was studied for nipple fissure and pain in lactating women. The ointment consisted of 7 grams of beeswax, 10 grams of ghee and 7 grams of Saqez (oleoresin made from scratching the trunks of Pistacia atlantica trees). Either the ointment or expressed breastmilk was applied 3 times daily to the nipple fissure and areola. Pain and serious nipple fissures were less severe in the treatment group than in the control group who applied expressed breastmilk to their fissures.[4,5]

### References

1 Altınsoy KE, Oktay MM. Acute hepatitis associated with intake of Pistacia vera L. bud tea; A case report. Arch Acad Emerg Med 2023;11:e35.37215235
2 Kahveci M, Koken G, Şahiner ÜM, et al. Immunoglobulin E-mediated food allergies differ in east Mediterranean children aged 0-2 years. Int Arch Allergy Immunol 2020;181:365-74.32097952
3 Villalobos V, Betancor D, Pastor-Vargas C, et al. Pistachio allergens: The long journey between mother and daughter. J Investig Allergol Clin Immunol 2023;33:64-5.35332872
4 As'adi N, Kariman N, Mojab F, et al. The effect of Saqez (Pistacia atlantica) ointment on nipple fissure improvement in breastfeeding women during one-month follow-up. Avicenna J Phytomed 2017;7:477-85.29299430
5 As'adi N, Kariman N, Mojab F, et al. The effect of Saqez (Pistacia atlantica) ointment on the treatment of nipple fissure and nipple pain in breastfeeding women. Electron Physician 2017;9:4952-60.28979728

## Substance Identification

### Substance Name

Pistachio

### Scientific Name

Pistacia vera

Pistacia atlantica

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Food

Phytotherapy

Plants, Medicinal